# Iodohippurate Sodium I 131

CASRN: 881-17-4

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of iodohippurate sodium I 131 (ortho-iodohippurate sodium I 131; I-131 OIH) as a diagnostic agent. A US Nuclear Regulatory Commission subcommittee has recommended that breastfeeding should be interrupted for 4 hours after administration of I-131 OIH, while others recommend no discontinuation with doses of 11.1 MBq (0.3 mCi) or less.[1,2] However, some experts recommend nursing the infant just before administration of the radiopharmaceutical and interrupting breastfeeding for 12 to 30 hours after the dose.[3-5] If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[3,6,7] Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[8]

Nursing mothers should not work with substances containing I 131 in their workplace.[9]

### Drug Levels

I 131 is a beta and high-energy gamma emitter with a main gamma emission energy of 364 keV and a physical half-life of 8.04 days.[1] The effective half-life of I-131 OIH averages 4.5 to 6.3 hours (range 2.2 to 7.6 hours).[3,4,8] About 2.4% of an administered dose is excreted into breastmilk.[4]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Dilsizian V, Metter D, Palestro C, et al. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
2 Stabin M. Doses from medical radiation sources. https://hps.org/hpspublications/articles/dosesfrommedicalradiation.html. Accessed Nov 6, 2024.
3 Mountford P, Coakley A. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
4 Leide-Svegborn S, Ahlgren L, Johansson L, et al. Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging 2016;43:808-21.26732471
5 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44:7-321. doi:10.1177/0146645314558019 26069086
6 Early P, Sodee D. Principles and practice of nuclear medicine. 2nd ed. St. Louis: Mosby-Year Book, Inc; 1995.
7 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020. https://www.gov.uk/government/publications/arsac-notes-for-guidance
8 Stabin M, Breitz H. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203
9 Almén A, Mattsson S. Radiological protection of foetuses and breast-fed children of occupationally exposed women in nuclear medicine - Challenges for hospitals. Phys Med 2017;43:172-7.28882410

## Substance Identification

### Substance Name

Iodohippurate Sodium I 131

### CAS Registry Number

881-17-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Iodine Radioisotopes

Diagnostic Agents